# Pamidronate

CASRN: 40391-99-9

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of pamidronate of 30 mg intravenously produce very low levels in milk. Because pamidronate has a serum half-life of about 3 hours, is highly bound to calcium and is poorly absorbed orally (0.3 to 3% in adults), absorption of pamidronate by a breastfed infant is unlikely.[1] Until more data become available, withholding nursing for 12 to 24 hours after a dose should ensure that the breastfed infant is exposed to little pamidronate. Other evidence indicates that breastfeeding after cessation of long-term pamidronate treatment appears to have no adverse effects on the infant. Some experts recommend monitoring the infant's serum calcium during the first weeks postpartum if the mother received pamidronate during pregnancy or nursing.[2]

### Drug Levels

Maternal Levels. A woman who was 6 months postpartum received a single intravenous dose of pamidronate 30 mg. She pumped her breasts for 48 hours after the dose and collected the milk in 2 portions for analysis: 0 to 24 hours and 25 to 48 hours. Pamidronate was not detected (<94 mcg/L) in either portion of breastmilk.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother received intravenous pamidronate 30 mg once monthly beginning 6 months postpartum. She pumped her breasts and discarded the milk for 48 hours after each dose. The infant, who was about 80% breastfed throughout maternal pamidronate therapy, remained healthy and grew normally during this time.[1]

Because pamidronate can persist in the body for years after long-term administration, the following cases may be relevant. Three women received pamidronate intravenously for osteogenesis imperfecta or McCune-Albright syndrome in cumulative dosages of 6, 7.5 and 9 mg/kg annually for 2 years, 4 years, and 2.2 years, respectively. Their last doses were 3 months, 3 and 48 months (2 infants), and 21 months prior to conception, respectively. None of the women resumed pamidronate during breastfeeding, but they all breastfed their infants postpartum, one for 18 months, two for undetermined times, and one for 6 weeks. None of the infants had any evidence of adverse effects of pamidronate.[3]

One mother received intravenous pamidronate infusions preconception and during pregnancy. She received a total of 240 mg with the final dose during the first trimester of pregnancy. She exclusively breastfed her infant for 6 months and continued breastfeeding until the infant was 12 months old. Her infant grew normally and had no adverse reactions.[4]

A woman received alendronate for 6 months, then pamidronate every 4 months for 1 year prior to conception. Her infant was breastfed (extent not stated) for 3 months. The infant had mild hypocalcemia at 2 months of age, but a normal calcium level and normal long bone development at 5 months of age.[5]

A woman developed transient osteoporosis with foot pain during pregnancy. On days 3 and 8 postpartum and 2 months later, she received 30 mg of pamidronate intravenously. She was instructed to discard her breastmilk for 24 hours after each dose. Her breastfed (extent not stated) infant had normal growth and development at 15 months of age.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Siminoski K, Fitzgerald AA, Flesch G, et al. Intravenous pamidronate for treatment of reflux sympathetic dystrophy during breastfeeding. J Bone Miner Res 2000;15:2052–5.11028460
2 Stathopoulos IP, Liakou CG, Katsalira A, et al. The use of bisphosphonates in women prior to or during pregnancy and lactation. Hormones 2011;10:280–91.22281884
3 Chan B, Zacharin M. Maternal and infant outcome after pamidronate treatment of polyostotic fibrous dysplasia and osteogenesis imperfecta before conception: A report of four cases. J Clin Endocrinol Metab 2006;91:2017–20.16551739
4 Mastaglia SR, Watman NP, Oliveri B. Intravenous bisphosphonate treatment and pregnancy: Its effects on mother and infant bone health. Osteoporos Int 2010;21:1959–62.20535608
5 Hassen-Zrour S, Korbaa W, Bejia I, et al. Maternal and fetal outcome after long-term bisphosphonate exposure before conception. Osteoporos Int 2010;21:709–10.19533208
6 Shenker NG, Shaikh MF, Jawad AS. Transient osteoporosis associated with pregnancy: Use of bisphosphonate in treating a lactating mother. BMJ Case Rep 2010;2010

## Substance Identification

### Substance Name

Pamidronate

### CAS Registry Number

40391-99-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Bisphosphonates

Bone Density Conservation Agents

Diphosphonates